# Chikungunya Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Two forms of chikungunya vaccine are marketed. One is a recombinant vaccine (Vimkunya, Bavarian Nordic) and the other is a live, attenuated vaccine (Ixchiq, Valneva). No information is available on the clinical use of either chikungunya vaccine during breastfeeding, but recombinant vaccines are generally considered to be acceptable during breastfeeding. Wild-type chikungunya virus ribonucleic acid has been detected in breastmilk, but transmission through breastfeeding has not been reported. The US Centers for Disease Control and Prevention recommend caution in administration of the live, attenuated vaccine to nursing mothers, but it is not contraindicated. Some countries contraindicate the use of the life, attenuated virus in nursing mothers.[1] If the mother requires a chikungunya vaccine, it is not a reason to discontinue breastfeeding, but the recombinant vaccine is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hills SL, Shlim DR, Schofield S, et al. Chikungunya vaccination for travelers: Practical guidance for clinical decision-making. J Travel Med 2025;32:taaf118 41263506

## Substance Identification

### Substance Name

Chikungunya Vaccine, Live

### Drug Class

Breastfeeding

Lactation

Milk, Human

Vaccines